# Vutrisiran

CASRN: 1867157-35-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of vutrisiran during breastfeeding. Because vutrisiran is a large oligonucleotide, the amount in milk is likely to be very low and absorption by the infant is probably minimal. If vutrisiran is required by the mother, it is not a reason to discontinue breastfeeding. Until more data become available, use vutrisiran with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Vutrisiran

### CAS Registry Number

1867157-35-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

RNA, Small Interfering